# Sodium Iodide I 131

CASRN: 7790-26-3

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of sodium iodide I 131 as a diagnostic and therapeutic agent. The use of I 131 is contraindicated during lactation and breastfeeding should be discontinued permanently for this child after administration of sodium iodide I 131 in a dose of 0.01 MBq (0.004 mCi) or greater to a nursing mother.[1-6] The American Thyroid Association recommends using I 123 or Tc99m pertechnetate scans for diagnosis of hyperthyroidism in nursing mothers, with Tc99m preferred because of its shorter half-life.[1] Ceasing breastfeeding at least 6 to 12 weeks before receiving a therapeutic dose of sodium iodide I 131 is recommended to reduce the radiation dose to the breasts and the risk of milk leakage that can contaminate clothing with radioactive iodine.[1-6] Breastfeeding after receiving I 131 would decrease the dose to the target organ (e.g., thyroid) and could decrease the effectiveness of the treatment. Nursing mothers should not work with substances containing I 131 in their workplace.[7]

Parents should refrain from close contact with their infants after therapeutic iodine I 131 administration. The exact duration depends on the dose administered, condition being treated, and source of the recommendation.[8,9] Recommended times range from 15 to 27 days after hyperthyroidism treatment, 16 to 24 days after ablation of thyroid cancer, and 4 to 5 days after follow-up therapy of thyroid ablation therapy.[9]

### Drug Levels

I 131 is a beta and high-energy gamma emitter with a main gamma emission energy of 364 keV and a physical half-life of 8.04 days.[10] Estimates of the average effective half-life of sodium iodide I 131 vary from 9.2 hours to 14 hours, and it may be as long as 48 hours in some patients. Iodide is actively secreted into breastmilk by the NaI symporter, which is stimulated by lactation, and actively taken up by the mother’s and infant’s thyroid glands.[11] About 31% (range 25% to 48%) of administered radioactivity is excreted into breastmilk after administration of sodium iodide I 131.[12,13]

One 29-year-old woman was given 3574 MBq of I 131 to treat thyroid cancer. The radioactivity was measured in all breastmilk expressed over 22 days (105 samples) and one additional sample at day 44. Whole-body and SPECT-CT images were acquired 44 hours after administration and the breast dosage was calculated. Infant exposure was estimated as the sum of external radiation (contact) and internal contamination (ingestion), using the 1 mSv total effective dose limit for the public as a safety threshold. Breastmilk I 131 was excreted with biphasic clearance with half-lives 0.49 and 1.82 days. The excretion into milk represents approximately 15% of the administered activity, which could also decrease the effectiveness of the drug in the mother by 15%. Breast absorbed dose was 569 mGy. The estimated total infant radiation dosage ranged from 0.62 to 688 mSv and thyroid dose from 0.1 mGy to 13,400 mGy, depending on breastfeeding timing. The total dosage stabilized 20 to 30 days after administration. Modeling showed that resuming breastfeeding 9 to 10 days after therapy keeps infant dosage under 1 mSv and infant thyroid dose below 10 mGy. Using a stricter safety criterion of radioactivity less than twice the background level of 0.23 Bq/mL), resumption was proposed at 51 days.[14]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hyperthyroidism Diagnosis) Sodium Pertechnetate Tc 99m, Sodium Iodide I 123; (Hyperthyroidism Treatment) Propylthiouracil, Methimazole

### References

1 Mattsson S, Johansson L, Leide Svegborn S, . Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):7-321.
2 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018 https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
3 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020 https://www.gov.uk/government/publications/arsac-notes-for-guidance
4 Mitchell KB, Fleming MM, Anderson PO, . ABM Clinical Protocol #30: Radiology and nuclear medicine studies in lactating women. Breastfeed Med 2019;14:290-4.31107104
5 Trout AT, Boike TP, Avram AM, . ACR-ACNM-ARS-SNMMI-SPR Practice Parameter for Treatment of Benign and Malignant Thyroid Disease With I-131 Sodium Iodide. Am J Clin Oncol 2026;49:51-61.40694360
6 Korevaar TIM, Leung AM, Alexander EK, . American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481-544.42219800
7 Almén A, Mattsson S. Radiological protection of foetuses and breast-fed children of occupationally exposed women in nuclear medicine - Challenges for hospitals. Phys Med 2017;43:172-7.28882410
8 Siegel JA, Marcus CS, Stabin MG. Licensee over-reliance on conservatisms in NRC guidance regarding the release of patients treated with 131I. Health Phys 2007;93:667-77.17993847
9 Anon. ICRP Publication 94. Release of patients after therapy with unsealed radionuclides. Ann ICRP 2004;34:v-vi, 1-79.15571759
10 Dilsizian V, Metter D, Palestro C, . Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019 https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
11 Ramesh S, Basu S. Differential physiological sodium iodide symporter expression in lactating breasts. J Assoc Physicians India 2022;70:11-2.
12 Mountford PJ, Coakley AJ. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
13 Leide-Svegborn S, Ahlgren L, Johansson L, . Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging 2016;43:808-21.26732471
14 Chaib S, Castellnou S, Keniza T, . Estimation of the delay for resumption of breastfeeding after 131-iodine therapy by milk radioactivity measurement. Eur Thyroid J 2026;15:ETJ260012.42340811

## Substance Identification

### Substance Name

Sodium Iodide I 131

### CAS Registry Number

7790-26-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Iodine Radioisotopes